# Azithromycin

CASRN: 83905-01-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of azithromycin in breastmilk and use in infants in higher doses, it would not be expected to cause adverse effects in breastfed infants. Monitor the infant for possible effects on the gastrointestinal flora, such as vomiting, diarrhea, candidiasis (thrush, diaper rash).

Maternal use of an eye drop that contains azithromycin presents negligible risk for the nursing infant. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. A woman who was 1 day postpartum was given 1 g of azithromycin orally. Forty-eight hours later her milk azithromycin was 0.64 mg/L. An oral regimen of 500 mg daily for 5 days was started, and more milk samples were obtained. One hour after the first dose, breastmilk contained 1.3 mg/L and 30 hours after the third dose milk contained 2.8 mg/L.[1] Because of the slow clearance and accumulation of azithromycin, it is difficult to interpret these milk levels. The dose that the infant would receive in milk would gradually increase for several days because maternal blood levels would increase until steady-state had been reached. If the level of 2.8 mg/L is used as an approximate trough level, an exclusively breastfed infant would receive a minimum of 0.42 mg/kg daily compared to the dose of 5 to 10 mg/kg daily used in infants of 6 months and over.

In a study of 30 women given azithromycin 500 mg intravenously 15, 30 or 60 minutes prior to incision for cesarean section, 8 women extracted breastmilk by pump. Breastmilk (colostrum) samples were obtained between 12 and 48 hours after the dose. Azithromycin persisted in breastmilk up to 48 hours after a dose with a median breastmilk concentration of 1713 mcg/L at a median of 30.7 hours after the dose. A computer model was constructed and the calculated median half-life in breastmilk was 15.6 hours, which was longer than the maternal serum half-life of 6.7 hours. Using the model, the authors calculated that with continuous administration of 500 mg every 12 hours, steady-state would occur in 3 days and an exclusively breastfed infant would receive 0.1 mg/kg daily.[2]

Breastmilk azithromycin concentrations were measured in 20 Gambian women after receiving a single 2 gram oral dose of azithromycin during labor. Breastmilk samples were collected on days 2 and 6 postpartum as well as 2 and 4 weeks postpartum (80 samples total, of which 78 were used). Milk concentrations were entered into a previously existing population model of azithromycin pharmacokinetics in pregnant women. The median cumulative infant dosage over the first 28 days postpartum was estimated to be 3.9 mg/kg (0.6 mg/kg daily) for the single 2 gram maternal dose. The authors also simulated a maternal dosage regimen of 1 gram daily for 3 days and estimated an infant dosage of 7.8 mg/kg (1.2 mg/kg daily). These values translate to a weight-adjusted dosage of 2.2% and 2.9% of the maternal dosage, respectively. The median absolute dosages are considerably less than the reported infant dosages of 50 to 60 mg/kg; however, simulations indicated that the maximum dosage that an infant might receive is 32 and 63 mg/kg, respectively, of the standard infant dosage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cohort study of infants diagnosed with infantile hypertrophic pyloric stenosis found that affected infants were 2.3 to 3 times more likely to have a mother taking a macrolide antibiotic during the 90 days after delivery. Stratification of the infants found the odds ratio to be 10 for female infants and 2 for male infants. All the mothers of affected infants nursed their infants. Most of the macrolide prescriptions were for erythromycin, but only 7% were for azithromycin. However, the authors did not state which macrolide was taken by the mothers of the affected infants.[4]

A retrospective database study in Denmark of 15 years of data found a 3.5-fold increased risk of infantile hypertrophic pyloric stenosis in the infants of mothers who took a macrolide during the first 13 days postpartum, but not with later exposure. The proportion of infants who were breastfed was not known, but probably high. The proportion of women who took each macrolide was also not reported.[5]

A study comparing the breastfed infants of mothers taking amoxicillin to those taking a macrolide antibiotic found no instances of pyloric stenosis. However, most of the infants exposed to a macrolide in breastmilk were exposed to roxithromycin. Only 10 of the 55 infants exposed to a macrolide were exposed to azithromycin. Adverse reactions occurred in 12.7% of the infants exposed to macrolides which was similar to the rate in amoxicillin-exposed infants. Reactions included rash, diarrhea, loss of appetite, and somnolence.[6]

Eight women who were given azithromycin 500 mg intravenously 15, 30 or 60 minutes prior to incision for cesarean section breastfed their newborn infants. No adverse events were noted in their infants.[2]

Two meta-analyses failed to demonstrate a relationship between maternal macrolide use during breastfeeding and infantile hypertrophic pyloric stenosis.[7,8]

### Effects on Lactation and Breastmilk

In a double-blind, controlled study in Gambia, women who were nasopharyngeal carriers of Staphylococcus aureus, Streptococcus pneumoniae or group B streptococcus were given a single 2 gram dose of azithromycin during labor. Milk samples from women who received azithromycin had 9.6% prevalence of carriage of the organisms compared to 21.9% in women who received placebo. Nasopharyngeal carriage in mothers and infants was also reduced on day 6 postpartum.[9] However, a later analysis found oral intrapartum azithromycin did not reduce carriage of Escherichia coli and Klebsiella pneumoniae and was associated with an increase in the prevalence of azithromycin-resistant E. coli and K. pneumoniae isolates in breastmilk.[10]

### Alternate Drugs to Consider

Clarithromycin, Erythromycin

### References

1 Kelsey JJ, Moser LR, Jennings JC, et al. Presence of azithromycin breast milk concentrations: A case report. Am J Obstet Gynecol 1994;170:1375-6.8178871
2 Sutton AL, Acosta EP, Larson KB, et al. Perinatal pharmacokinetics of azithromycin for cesarean prophylaxis. Am J Obstet Gynecol 2015;212:812.e1-6.25595580
3 Salman S, Davis TM, Page-Sharp M, et al. Pharmacokinetics of transfer of azithromycin into the breast milk of African mothers. Antimicrob Agents Chemother 2015;60:1592-9.26711756
4 Sørensen HT, Skriver MV, Pedersen L, et al. Risk of infantile hypertrophic pyloric stenosis after maternal postnatal use of macrolides. Scand J Infect Dis 2003;35:104-6.12693559
5 Lund M, Pasternak B, Davidsen RB, et al. Use of macrolides in mother and child and risk of infantile hypertrophic pyloric stenosis: Nationwide cohort study. BMJ 2014;348:g1908.24618148
6 Goldstein LH, Berlin M, Tsur L, et al. The safety of macrolides during lactation. Breastfeed Med 2009;4:197-200.19366316
7 Abdellatif M, Ghozy S, Kamel MG, et al. Association between exposure to macrolides and the development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Eur J Pediatr 2019;178:301-14.30470884
8 Almaramhy HH, Al-Zalabani AH. The association of prenatal and postnatal macrolide exposure with subsequent development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Ital J Pediatr 2019;45:20.30717812
9 Roca A, Oluwalana C, Bojang A, et al. Oral azithromycin given during labour decreases bacterial carriage in the mothers and their offspring: A double-blind randomized trial. Clin Microbiol Infect 2016;22:565.e1-9.27026482
10 Getanda P, Bojang A, Camara B, et al. Short-term increase in the carriage of azithromycin-resistant Escherichia coli and Klebsiella pneumoniae in mothers and their newborns following intra-partum azithromycin: A post hoc analysis of a double-blind randomized trial. JAC-Antimicr Res 2021;3:dlaa128.

## Substance Identification

### Substance Name

Azithromycin

### CAS Registry Number

83905-01-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Bacterial Agents

Anti-Infective Agents

Macrolides